# Parenteral Nutrition

## Drug Levels and Effects

### Summary of Use during Lactation

Several women receiving either partial or total parenteral nutrition have reportedly breastfed their infants successfully. One prominent group encourages lactation among their patients receiving parenteral nutrition if the mother wishes, with the understanding that formula supplementation may be necessary depending on the adequacy of her milk supply. Infants' growth should be monitored closely as a means of determining adequate nutrition.[1]

Intravenous amino acids used alone in postpartum mothers may hasten the onset of lactation and increase weight gain in their breastfed infants.[2]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A woman with chronic intestinal pseudo-obstruction was treated with home parenteral nutrition 5 days a week for 5 years at which time she became pregnant. She was maintained on parenteral nutrition during pregnancy and postpartum while she successfully breastfed her infant on the same regimen used during pregnancy.[3] Twenty months after the first delivery, the mother became pregnant again and delivered a full-term infant by cesarean section. Parenteral nutrition was increased to 7 days a week and she successfully breastfed her second infant with slight modifications in the parenteral nutrition formula.[4]

A woman was treated with home parenteral nutrition for 24 years for chronic intestinal pseudo-obstruction. She became pregnant at age 25 and continued with parenteral nutrition that was adjusted as pregnancy progressed. She delivered a preterm infant by cesarean section at 33 weeks gestation and was able to partially breastfeed her infant.[5]

A woman with maple syrup urine disease had been treated since birth with special oral formulas low in branched-chain amino acids. She became pregnant and was maintained with oral nutrition until week 37 when partial parenteral nutrition was begun to met increased metabolic demands. Following a cesarean section, the mother successfully breastfed (extent not stated) her infant for over 6 months. Infant growth at 7 months was normal and the Bayley Scales of Infant and Toddler Development Cognitive Composite Score was above average.[6]

A 26-year-old woman who was receiving long-term home parenteral nutrition due to short bowel syndrome caused by recurrent thromboembolic mesenteric infarctions. During the third trimester and postpartum, she received only home parenteral nutrition. Following a cesarean section at 37 weeks, she breastfed (extent not stated) her infant. The infant was judged as doing well at 6 months of age and thriving at 1 year of age.[7]

### Effects on Lactation and Breastmilk

Several case reports exist in which a mother receiving either partial or total parenteral nutrition successfully breastfed an infant.[1,3-8]

A randomized, controlled, but unblinded study compared lactation onset and duration among women who on the first day postpartum received intravenous infusions of saline (n = 152) daily for 4 days to those who received intravenous amino acids (n = 153) for 4 days (containing isoleucine 5.6 mg, leucine 12.5 mg, lysine hydrochloride 11 mg, methionine 3.5 mg, phenylalanine 9.35 mg, threonine 6.5 mg, tryptophan 1.3 mg, valine 4.5 mg, histidine hydrochloride 8.11 mg, arginine hydrochloride 9.55 mg, alanine 6.2 mg, aspartic acid 3.8 mg, cysteine hydrochloride 1.45 mg, glutamic acid 6.5 mg, proline 3.3 mg, serine 2.2 mg, tyrosine 0.35 mg, glycine 10.7 mg, and xylitol 50.0 mg.) A greater percentage of mothers receiving amino acids achieved lactation onset on the first day postpartum than with saline (86% vs 32%). All mothers in the amino acid group achieved lactation by day 2 postpartum, compared to day 3 postpartum in the saline group. Weight gain in the infants of mothers who received amino acids was greater than thos who received saline at 2 weeks and 1 month of age. Infants in the amino acid group had better sleep than those in the saline group. A quarter of women in the amoino acid group dropped out of the study because of excessive milk production.[2]

### References

1 Rayburn W, Wolk R, Mercer N, et al. (1986). Parenteral nutrition in obstetrics and gynecology. Obstet Gynecol Surv.
2 Nagarathnamma R, Bhushan P, Dutta T, et al. (2020). A prospective, randomized, placebo-controlled comparative study of amino acid supplementation in lactation insufficiency. J SAFOG.
3 Campo M, Albinana S, García-Burguillo A, et al. (2000). Pregnancy in a patient with chronic intestinal pseudo-obstruction on long-term parenteral nutrition. Clin Nutr.
4 Moreno JM, Gomis P. (2002). Pregnancy in a patient with chronic intestinal failure on long-term parenteral nutrition. Clin Nutr.
5 Elchlal U, Sela HY, Gimmon Z. (2009). Defying physical limitations: Successful pregnancy and birth in a patient on home total parenteral nutrition since infancy. Eur J Obstet Gynecol Reprod Biol.
6 Wessel AE, Mogensen KM, Rohr F, et al. (2015). Management of a woman with maple syrup urine disease during pregnancy, delivery, and lactation. JPEN J Parenter Enteral Nutr.
7 Buchholz BM, Ruland A, Kiefer N, et al. (2015). Conception, pregnancy, and lactation despite chronic intestinal failure requiring home parenteral nutrition. Nutr Clin Pract.
8 Borbolla Foster A, Dixon S, Tyrrell-Price J, et al. (2016). Pregnancy and lactation during long-term total parenteral nutrition: A case report and literature review. Obstet Med.

## Substance Identification

### Substance Name

Parenteral Nutrition

### Drug Class

Breast Feeding

Lactation

Parenteral Nutrition